# Thyroid

CASRN: 8028-36-2

## Drug Levels and Effects

### Summary of Use during Lactation

Thyroid is an animal-derived mixture of levothyroxine (T4) and liothyronine (T3), which are normal components of human milk. Limited data on exogenous replacement doses of levothyroxine during breastfeeding indicate no adverse effects in infants. If the mother requires thyroid, it is not a reason to discontinue breastfeeding. The American Thyroid Association recommends that subclinical and overt hypothyroidism should be treated with levothyroxine in lactating women seeking to breastfeed.[1] Thyroid dosage requirement may be increased in the postpartum period compared to prepregnancy requirements patients with Hashimoto's thyroiditis.[2]

### Drug Levels

In a study of a new analytic technique, concentrations of several thyroid hormones were measured in 30 milk samples. The mean levothyroxine (T4) concentration was 94 mcg/L (range 48 to 194 mcg/L) and the mean dextrothyroxine concentration was 135 mcg/L (range 115 to 158 mcg/L). The mean liothyronine (T3) concentration was 52 mcg/L (range 32 to 109 mcg/L) and the mean reverse T3 concentration was 65 mcg/L (range 21 to 180 mcg/L). Among the 30 samples, the dextrothyroxine concentration was always higher than the levothyroxine concentration, and the reverse T3 concentration was always higher than the liothyronine concentration. The levels of levothyroxine were also higher than liothyronine levels. Several other thyroid hormones such as thyroxine; monoiodothyronine; 3,3 and 3,5-diiodothyronine were also measured.[3]

Although somewhat controversial, it appears that levothyroxine passes into milk poorly and that liothyronine might pass into milk in amounts that affect infant thyroid status.[4-8]

Maternal Levels. In a study of 56 mothers with thyroid disorders, 50 had hypothyroidism and were being treated with levothyroxine; 5 mothers had controlled hyperthyroidism with no medications and 1 had hyperthyroidism treated with a medication. Milk levels of thyroid hormones were free T4 4.5 ng/L, total T4 29.6 mcg/L, free T3 2.3 ng/L and total T3 0.35 mcg/L. The average milk to serum level ratios over the period were free T4 0.32, total T4 0.3, free T3 0.78 and total T3 0.26. Levels of free and total T3 and total T4 in milk were positively correlated with their respective plasma levels.[9]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Effects of exogenous thyroid hormone administration to mothers on their infants have not been reported. One case of apparent mitigation of cretinism in hypothyroid infants by breastfeeding has been reported, but the amounts of thyroid hormones in milk are not optimal, and this result has been disputed.[10,11] The thyroid hormone content of human milk from the mothers of very preterm infants appears not to be sufficient to affect the infants' thyroid status.[12] The amounts of thyroid hormones in milk are apparently not sufficient to interfere with diagnosis of hypothyroidism.[13]

In a telephone follow-up study, 5 nursing mothers reported taking levothyroxine (dosage unspecified). The mothers reported no adverse reactions in their infants.[14]

One mother who had undergone a thyroidectomy was taking levothyroxine 100 mcg daily as well as calcium carbonate and calcitriol. Her breastfed infant was reportedly "thriving" at 3 months of age.[15]

### Effects on Lactation and Breastmilk

Adequate thyroid hormone serum levels are required for normal lactation. Replacing deficient thyroid levels should improve milk production caused by hypothyroidism. Supraphysiologic doses would not be expected to further improve lactation.

### References

1 Korevaar TIM, Leung AM, Alexander EK, et al. American Thyroid Association 2026 Guidelines for Thyroid Disease in Preconception, Pregnancy, and Postpartum. Thyroid 2026;36:481–544.42219800
2 Galofré JC, Haber RS, Mitchell AA, et al. Increased postpartum thyroxine replacement in Hashimoto's thyroiditis. Thyroid 2010;20:901–8.20615129
3 de Fátima Vélez-Pérez R, Arias-Borrego A, Velasco I, et al. Liquid chromatography (ion mobility) coupled to organic and inorganic mass spectrometry for determination of eight thyroid hormones in human milk with enantiomeric separation of thyroxine. Food Chem 2025;492:145542.40716411
4 Sato T, Suzuki Y. Presence of triiodothyronine, no detectable thyroxine and reverse triiodothyronine in human milk. Endocrinol Jpn 1979;26:507–13.499092
5 Varma SK, Collins M, Row A, et al. Thyroxine, tri-iodothyronine, and reverse tri-iodothyronine concentrations in human milk. J Pediatr 1978;93:803–6.712487
6 Mallol J, Obregon MJ, Morreale de Escobar GM. Analytical artifacts in radioimmunoassay of L-thyroxin in human milk. Clin Chem 1982;28:1277–82.7074933
7 Oberkotter LV, Tenore A. Separation and radioimmunoassay of T3 and T4 in human breast milk. Horm Res 1983;17:11–8.6551313
8 Koldovský O. Hormones in milk. Vitam Horm 1995;50:77–149.7709605
9 Zhang Q, Lian XL, Chai XF, et al. [Relationship between maternal milk and serum thyroid hormones in patients with thyroid related diseases]. Zhongguo Yi Xue Ke Xue Yuan Xue Bao 2013;35:427–31.23987491
10 Bode HH, Vanjonack WJ, Crawford JD. Mitigation of cretinism by breast-feeding. Pediatrics 1978;62:13–6.683777
11 Letarte J, Guyda H, Dussault JH, et al. Lack of protective effect of breast-feeding in congenital hypothyroidism: Report of 12 cases. Pediatrics 1980;65:703–5.7367075
12 van Wassenaer AG, Stulp MR, Valianpour F, et al. The quantity of thyroid hormone in human milk is too low to influence plasma thyroid hormone levels in the very preterm infant. Clin Endocrinol (Oxf) 2002;56:621–7.12030913
13 Abbassi V, Steinour A. Successful diagnosis of congenital hypothroidism in four breast-fed neonates. J Pediatr 1980;97:259–61.7400893
14 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393–9.8498418
15 Caplan RH, Wickus GG. Reduced calcitriol requirements for treating hypoparathyroidism during lactation. A case report. J Reprod Med 1993;38:914–8.8277494

## Substance Identification

### Substance Name

Thyroid

### CAS Registry Number

8028-36-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Thyroid Hormones